# Paromomycin

CASRN: 7542-37-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of paromomycin during breastfeeding. Because paromomycin is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Davidson RN, den Boer M, Ritmeijer K. Paromomycin. Trans R Soc Trop Med Hyg 2009;103:653-60.18947845

## Substance Identification

### Substance Name

Paromomycin

### CAS Registry Number

7542-37-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Amebicides

Anti-Bacterial Agents

Aminoglycosides